# Darbepoetin

CASRN: 209810-58-2

## Drug Levels and Effects

### Summary of Use during Lactation

The excretion of darbepoetin alfa in breastmilk or its effects on breastfed infants have not been studied. However, erythropoietin is a normal component of human milk and darbepoetin is immunologically and biologically indistinguishable from native erythropoietin. Intravenous darbepoetin has been given safely to newborn infants in doses much larger than those expected to appear in breastmilk. No special precautions are required during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information on exogenous administration of darbepoetin alfa to nursing mothers was not found as of the revision date. However, breastmilk normally contains erythropoietin.[1]

Infant Levels. Published information on absorption of darbepoetin alfa from breastmilk was not found as of the revision date. However, several studies in which oral doses of epoetin alfa and other recombinant forms of erythropoietin were given to preterm infants found that epoetin is absorbed to a small extent. Increases in hematocrit in infants treated with oral epoetin alfa have been small to negligible.[2-7] However, one study found that hospitalized preterm infants taking enteral feedings and given 400 units daily of recombinant human erythropoietin by mouth with ferrous sulfate had higher reticulocyte counts and serum erythropoietin concentrations upon hospital discharge than control infants given only ferrous sulfate.[8]

### Effects in Breastfed Infants

Enhancement of gastrointestinal tract maturation has been proposed as a function of erythropoietin in breastmilk.[1,8]

### Effects on Lactation and Breastmilk

In small studies, epoetin alfa administration decreased serum prolactin in patients with amyotrophic lateral sclerosis, but had no effect in normal subjects or in patients with renal failure undergoing chronic ambulatory peritoneal dialysis.[9-11] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Epoetin Alfa

### References

1 Semba RD, Juul SE. (2002). Erythropoietin in human milk: Physiology and role in infant health. J Hum Lact.
2 Pasha YZ, Ahmadpolir-Kacho M, Hajiahmadi M, et al. (2008). Enteral erythropoietin increases plasma erythropoietin level in preterm infants: A randomized controlled trial. Indian Pediatr.
3 Calhoun DA, Christensen RD. (2004). Hematopoietic growth factors in neonatal medicine: The use of enterally administered hematopoietic growth factors in the neonatal intensive care unit. Clin Perinatol.
4 Ballin A, Bilker-Reich A, Arbel E, et al. (1999). Erythropoietin, given enterally, stimulates erythropoiesis in premature infants. Lancet.
5 Juul SE. (2003). Enterally dosed recombinant human erythropoietin does not stimulate erythropoiesis in neonates. J Pediatr.
6 Juul SE, Christensen RD. (2003). Absorption of enteral recombinant human erythropoietin by neonates. Ann Pharmacother.
7 Britton JR, Christensen RD. (1995). Enteral administration of recombinant erythropoietin to preterm infants. J Perinatol.
8 Miller M, Iliff P, Stoltzfus RJ, et al. (2002). Breastmilk erythropoietin and mother-to-child HIV transmission through breastmilk. Lancet.
9 Tokgöz B, Utas C, Dogukan A, et al. (2002). Influence of long term erythropoietin therapy on the hypothalamic-pituitary-thyroid axis in patients undergoing CAPD. Ren Fail.
10 Bernini GP, Mariotti F, Brogi G, et al. (1993). Effects of erythropoietin administration on prolactin secretion in normal subjects. Nephron.
11 Markianos M, Kosmidis ML, Sfagos C. (2006). Reductions in plasma prolactin during acute erythropoietin administration. Neuro Endocrinol Lett.

## Substance Identification

### Substance Name

Darbepoetin

### CAS Registry Number

209810-58-2

### Drug Class

Breast Feeding

Lactation

Colony-Stimulating Factors

Hematinics

Hematopoietic Cell Growth Factors